# Emedastine

CASRN: 87233-61-2

## Drug Levels and Effects

### Summary of Use during Lactation

Emedastine is no longer marketed United States, but is available in other countries. Preliminary data indicate that oral administration of 2 mg daily produces low levels in milk and does not affect the breastfed infant.

When used as an eye drop, emedastine would not be expected to cause any adverse effects in breastfed infants. To substantially diminish the amount of drug that reaches the breastmilk after using eye drops, place pressure over the tear duct by the corner of the eye for 1 minute or more, then remove the excess solution with an absorbent tissue.

### Drug Levels

Maternal Levels. A woman was prescribed emedastine difumarate 2 mg once daily and pranlukast hydrate 112.5 mg twice daily during pregnancy and postpartum. Emedastine concentration in milk were measured on days 1 to 4 postpartum. Emedastine concentrations at 9.3 and 12.3 hours after a dose were 0.44 and 0.13 mcg/L, respectively. At 20.3, 22.5, and 23.3 hours after a dose, milk concentrations were 0.09, 0.07, and 0.06 mcg/L, respectively.[1]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

A woman was prescribed emedastine difumarate 2 mg once daily and pranlukast hydrate 112.5 mg twice daily during pregnancy and postpartum. Her infant was breastfed and no adverse effects were noted.[1]

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

(Oral Antihistamine) Cetirizine, Desloratadine, Fexofenadine, Levocetirizine, Loratadine

### References

1 Saito J, Yakuwa N, Sasaki A, et al. Emedastine during pregnancy and lactation: Emedastine levels in maternal serum, cord blood, breast milk, and neonatal serum. Breastfeed Med 2020;15:809-12.33035080

## Substance Identification

### Substance Name

Emedastine

### CAS Registry Number

87233-61-2

### Drug Class

Breast Feeding

Lactation

Milk, Human

Antihistamines